# Alatrofloxacin

CASRN: 157182-32-6

## Drug Levels and Effects

### Summary of Use during Lactation

Alatrofloxacin is no longer marketed in the US. No information is available on the clinical use of alatrofloxacin during breastfeeding. Fluoroquinolones have traditionally not been used in infants because of concern about adverse effects on the infants' developing joints. However, recent studies indicate little risk.[1,2] The calcium in milk might prevent absorption of the small amounts of fluoroquinolones in milk,[3] but insufficient data exist to prove or disprove this assertion. Use of alatrofloxacin is acceptable in nursing mothers with monitoring of the infant for effects on the gastrointestinal flora, such as diarrhea or candidiasis (thrush, diaper rash). However, it is preferable to use an alternate drug for which safety information is available.

### Drug Levels

Maternal Levels. The manufacturer reports that trovafloxacin was found in the breast milk of three lactating subjects. The average measurable breast milk concentration was 0.8 mcg/mL (range 0.3 to 2.1 mcg/mL) after a single intravenous alatrofloxacin dose equivalent to 300 mg of trovafloxacin. Further details on the study are not available.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ciprofloxacin, Levofloxacin

### References

1 Gürpinar AN, Balkan E, Kiliç N, et al. The effects of a fluoroquinolone on the growth and development of infants. J Int Med Res 1997;25:302-6.9364293
2 van den Oever HL, Versteegh FG, Thewessen EA, et al. Ciprofloxacin in preterm neonates: Case report and review of the literature. Eur J Pediatr 1998;157:843-5.9809826
3 Fleiss PM. The effect of maternal medications on breast-feeding infants. J Hum Lact 1992;8:7.1558663

## Substance Identification

### Substance Name

Alatrofloxacin

### CAS Registry Number

157182-32-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-infective Agents

Antibacterial Agents

Quinolones

Fluoroquinolones